# Terazosin

CASRN: 63590-64-7

## Drug Levels and Effects

### Summary of Use during Lactation

Because no information is available on the use of terazosin during breastfeeding, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information in nursing mothers was not found as of the revision date. However, the pharmacologically similar drug prazosin does not affect serum prolactin concentration in patients with hypertension.[1,2] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### Alternate Drugs

(Hypertension) Candesartan, Benazepril, Captopril, Enalapril, Lisinopril, Quinapril, Hydrochlorothiazide, Methyldopa, Propranolol

### References

1 Barbieri C, Caldara R, Ferrari C, et al. Metabolic effects of prazosin. Clin Pharmacol Ther 1980;27:313-6.6102000
2 Barbieri C, Ferrari C, Borzio M, et al. Metabolic effects of chronic prazosin treatment. Horm Metab Res 1980;12:331-4.6105121

## Substance Identification

### Substance Name

Terazosin

### CAS Registry Number

63590-64-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Adrenergic alpha-Antagonists

Antihypertensive Agents